# Aminosalicylic Acid

CASRN: 65-49-6

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal aminosalicylic acid therapy produces low levels in milk and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. Exclusively breastfed infants should be monitored for rare instances of jaundice, gastrointestinal disturbances, hypokalemia, thrombocytopenia, hemolysis and hypokalemia if this drug is used during lactation.[1]

### Drug Levels

Maternal Levels. One woman who was lactating, but not breastfeeding (time postpartum not stated) took a single 4 gram oral dose of aminosalicylic acid. A peak milk level of 1.1 mg/L occurred 3 hours after the dose. The drug's half-life in milk was estimated to be 2.5 hours.[1] Using these data, a fully breastfed infant would receive a maximum of about 0.25% of the maternal weight-adjusted dosage.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Aminosalicylic acid was used as part of multi-drug regimens to treat 2 pregnant women with multidrug-resistant tuberculosis throughout pregnancy and postpartum. Their two infants were breastfed (extent and duration not stated). At age 1.8 and 4.6 years, the children were developing normally, except for except for a mild speech delay in one at age 1.8 years, and failure to thrive in the other, possibly due to tuberculosis contracted after birth.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Holdiness MR. Antituberculosis drugs and breast-feeding. Arch Intern Med 1984;144:1888.6548112
2 Drobac PC, del Castillo H, Sweetland A, et al. Treatment of multidrug-resistant tuberculosis during pregnancy: Long-term follow-up of 6 children with intrauterine exposure to second-line agents. Clin Infect Dis 2005;40:1689-92.15889370

## Substance Identification

### Substance Name

Aminosalicylic Acid

### CAS Registry Number

65-49-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antitubercular Agents